# Fexinidazole

CASRN: 59729-37-2

## Drug Levels and Effects

### Summary of Use during Lactation

No adverse effects to breastfed infants have been associated with fexinidazole exposure through breastmilk based on a limited number of reported cases. If a mother requires fexinidazole, it is not a reason to discontinue breastfeeding. Until more data are available, fexinidazole should only be used during breastfeeding with careful infant monitoring for vomiting, insomnia, nausea, tremor, and decreased appetite.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

According to the manufacturer, no adverse effects to the breastfed child have been associated with fexinidazole exposure through breastmilk based on a limited number of reported cases.

In a phase 3b, prospective, open-label, non-randomized, cohort study of fexinidazole for treating gambiense African trypanosomiasis in the Democratic Republic of the Congo, 17 infants were breastfed (extent not stated, but probably exclusively). The babies developed normally, except one who died from a neonatal infection and two who died because of anemia in the context of severe or complicated malaria. None of these fatalities were considered related to fexinidazole.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kumeso VKB, Perdrieu C, Menétrey C, et al. Effectiveness and safety of fexinidazole for gambiense human African trypanosomiasis and exploration of adherence in outpatients: A phase 3b, prospective, open-label, non-randomised, cohort study. Lancet Glob Health 2025;13:e900–e09.40288399

## Substance Identification

### Substance Name

Fexinidazole

### CAS Registry Number

59729-37-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiprotozoal Agents

Nitroimidazoles